# Dexmethylphenidate

CASRN: 40431-64-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dexmethylphenidate during breastfeeding; however, the manufacturer estimates that a fully breastfed infant would receive a relative dose of 0.2 to 0.7% of the maternal weight-adjusted dose. Dexmethylphenidate is an isomer of methylphenidate. Methylphenidate levels in milk are low and not detectable in the serum of a few breastfed infants. If dexmethylphenidate is required by the mother, it is not a reason to discontinue breastfeeding.[1] It is possible that large dosages of dexmethylphenidate might interfere with milk production, especially in women whose lactation is not well established.

### Drug Levels

Dexmethylphenidate is the d-threo-isomer of methylphenidate. Information on methylphenidate during breastfeeding is listed below.

Maternal Levels. Three mothers were taking methylphenidate in an average dosage of 52 mg daily (range 35 to 80 mg daily) for attention deficit hyperactivity disorder. The average milk level was 19 mcg/L which resulted in an infant dosage of 2.9 mcg/kg daily or 0.7% of the maternal weight-adjusted dosage.[2]

The same authors reported a nursing mother who was taking methylphenidate, but it is unclear if this patient is one of those reported above. The mother was taking 40 mg twice daily, 5 days/week for 5.5 weeks prior to testing, but for 7 consecutive days immediately before collecting blood and milk samples after a morning dose of 40 mg. The average milk level of methylphenidate over the 24 hours after the dose was 15.4 mcg/L. The infant was calculated to receive 2.3 mcg/kg daily which was 0.2% of the maternal weight-adjusted dosage.[3]

A woman who was 11 months postpartum was taking oral immediate-release methylphenidate 5 mg in the morning and 10 mg at noon. The drug was undetectable (<0.3 mcg/L) before the morning dose and 21 hours after the noon dose. Three other levels ranged from1.7 to 3.8 mcg/L. The authors estimated that a fully breastfed infant would receive a dose of 0.38 mcg/kg daily or 0.16% of the maternal weight-adjusted dosage.[4]

A woman was taking 72 mg daily of slow-release methylphenidate. The drug was undetectable (assay limit not stated) in breastmilk at 6 to 12 months postpartum.[5]

A partially nursing mother was taking extended-release methylphenidate (Concerta) 36 mg daily and duloxetine 90 mg daily for ADHD, generalized anxiety disorder, borderline personality disorder, and depression. On day 29, a milk sample was taken 6.5 hours after her doses. The methylphenidate concentration in milk was 7.9 mcg/L with an estimated relative infant dosage of 0.2%, assuming milk intake of 150 mL/kg daily.[6]

Infant Levels. Methylphenidate blood levels were measured in 2 breastfed infants. These were 2 of 3 infants whose mothers were taking an average of 52 mg daily of methylphenidate. The drug was undetectable (<1 mcg/L) in the infants’ blood; however, the corresponding maternal dosages and times of blood collection were not stated in the abstract.[2]

A 6.4-month-old partially breastfed infant had been breastfed for 5.5 weeks by a mother taking methylphenidate 40 mg twice daily. The drug was undetectable (<1 mcg/L) in the infant’s plasma 5.3 hours after the mother’s dose and having been breastfed 4 times since the dose.[3] This patient might have been one of those in the report above by the same authors.

An infant was born to a mother with attention deficit-hyperactivity disorder who took a tapering dose of methylphenidate before and during pregnancy. The drug was stopped 10 days prior to delivery, but restarted after 5 weeks postpartum. Methylphenidate was undetectable (assay limit not stated) in the infant’s blood between 6 and 2 months of age when the mother was taking a dose of 72 mg of slow-release methylphenidate daily. The extent of breastfeeding was not stated.[5]

### Effects in Breastfed Infants

Seven of 8 infants, whose mothers were taking either dextroamphetamine (average dosage 25 mg daily) or methylphenidate (average dosage 52 mg daily) were clinically evaluated. The infants had no drug-related adverse reactions and were developing normally for their ages which averaged 4.4 months.[2]

One 6.4-month-old infant was mostly breastfed by a mother who had been taking methylphenidate 40 mg twice daily 5 days/week for 5.5 weeks. The mother reported that the infant was sleeping, eating and gaining weight normally.[3] This patient might have been one of those in the report above by the same authors.

An infant was being breastfed (extent not stated) by a mother who began taking sertraline 50 mg daily and methylphenidate after 5 weeks postpartum. The dosage was started at 10 mg daily with an immediate-release product and gradually increased to 72 mg daily of an extended-release product. At 14 weeks of age, the infant was developing normally with no feeding difficulties. Examinations at 6 months and 1 year of age found no developmental problems in the child.[5]

A nursing mother was taking extended-release methylphenidate (Concerta) 36 mg daily and duloxetine 90 mg daily for ADHD, generalized anxiety disorder, borderline personality disorder, and depression. She partially (amount not stated) breastfed her infant for about 1 month. At 6 months of age, the infant’s development was considered to be normal, except for recurrent pneumonia caused by congenital pulmonary airway malformation.[6]

A woman with narcolepsy discontinued methylphenidate during pregnancy, but continued sertraline 100 mg and a prenatal vitamin daily during pregnancy and postpartum. She expressed breastmilk for bottle feeding and her infant was fed breastmilk exclusively until 6 months of age, and was weaned at 7 months. When her infant was 13 weeks old, she resumed methylphenidate 10 mg three times daily. The infant met all growth milestones through 6 months of age.[7]

A woman who was taking extended-release bupropion 300 mg daily for depression was diagnosed with attention deficit/hyperactivity disorder. She started on immediate-release methylphenidate 5 mg daily which was increased to 5 mg twice daily by 2 months postpartum. At 3 months postpartum, she transitioned to an osmotically controlled-release formulation of methylphenidate oral tablet, beginning at 18 mg daily, which was subsequently increased to 27 mg daily at 4 months and then to 36 mg daily at 6 months postpartum. Her exclusively breastfed infant maintained normal growth and developmental milestones during the first 6.75 months of life.[8]

### Effects on Lactation and Breastmilk

Methylphenidate reduces serum prolactin,[9] but little information exists on the effect of methylphenidate on milk production. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A 15-year-old girl had been receiving methylphenidate 54 mg daily in an osmotic release tablet (OROS) for 2 years. Sertraline was started for depression at 50 mg daily and increased to 100 mg daily along with haloperidol 0.5 mg daily. After 12 weeks of therapy, inattentiveness at school and headaches prompted a change from the OROS product to a modified-release methylphenidate product (brand not specified) at 30 mg daily, then increasing to 50 mg daily. Three days after the increase in dosage, the girl had spontaneous milk flow from both breasts and subsequently had an elevated serum prolactin of 67.7 mcg/L. Methylphenidate and haloperidol were discontinued, but sertraline was continued. One week later, galactorrhea resolved completely. Fifteen days after drug discontinuation, the girl’s prolactin level was in the normal range at 19.4 mcg/L.[10]

A woman with narcolepsy discontinued methylphenidate during pregnancy, but continued sertraline 100 mg and a prenatal vitamin daily during pregnancy and postpartum. She expressed milk for bottle feeding for 7 months and kept records of her milk output. When her infant was 13 weeks old, she resumed methylphenidate 10 mg three times daily. The average volume per pump during weeks 13 to 15 after restarting methylphenidate was 243 mL which did not differ from that during weeks 6 to 8 which averaged 230 mL.[7]

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate (Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Oxybate Salts, Pitolisant

### References

1 Ornoy A. Pharmacological treatment of attention deficit hyperactivity disorder during pregnancy and lactation. Pharm Res 2018;35:46.29411149
2 Hackett LP, Ilett KF, Kristensen JH, . Infant dose and safety of breastfeeding for dexamphetamine and methylphenidate in mothers with attention deficit hyperactivity disorder. Ther Drug Monit 2005;27:220–1. doi:10.1097/00007691-200504000-00056
3 Hackett LP, Kristensen JH, Hale TW, . Methylphenidate and breast-feeding. Ann Pharmacother 2006;40:1890–1.16940409
4 Spigset O, Brede WR, Zahlsen K. Excretion of methylphenidate in breast milk. Am J Psychiatry 2007;164:348.
5 Bolea-Alamanac BM, Green A, Verma G, . Methylphenidate use in pregnancy and lactation: A systematic review of evidence. Br J Clin Pharmacol 2014;77:96–101.23593966
6 Collin-Lévesque L, El-Ghaddaf Y, Genest M, . Infant exposure to methylphenidate and duloxetine during lactation: A case report. Breastfeed Med 2018;13:221–5.29485905
7 Bello G, Poirier J, Sharkey KM. Successful lactation after resuming methylphenidate in a woman with narcolepsy. J Clin Sleep Med 2022;18:1891–4.35404225
8 Kim J, Nichols DA, Zhang T, . Managing attention-deficit/hyperactivity disorder in a breastfeeding mother: A case report. Pharmacotherapy 2025;45:529–34.40536085
9 Upadhyaya HP, Brady KT, Liao J, . Neuroendocrine and behavioral responses to dopaminergic agonists in adolescents with alcohol abuse. Psychopharmacology (Berl) 2003;166:95–101.12520313
10 Ekinci O, Gunes S, Ekinci N. Galactorrhea probably related with switching from osmotic-release oral system methylphenidate (MPH) to modified-release MPH: An adolescent case. Clin Psychopharmacol Neurosci 2017;15:282–4.28783939

## Substance Identification

### Substance Name

Dexmethylphenidate

### CAS Registry Number

40431-64-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Central Nervous System Stimulants

Dopamine Agents

Sympathomimetics

Wakefulness-Promoting Agents